# Vitamin D

CASRN: 67-97-0

## Drug Levels and Effects

### Summary of Use during Lactation

Vitamin D is a normal component of human milk. Daily maternal vitamin D_2_ or D_3_ supplementation in the 10 to 50 mcg (400 to 2,000 IU) range produces milk concentrations that are inadequate to deliver the daily requirement to an exclusively breastfed infant, and inadequate to correct pre-existing infant vitamin D deficiency through breastfeeding alone. Breastfeeding mothers who take vitamin D supplements in this range should give their infants a daily vitamin D supplement of at least 10 mcg (400 IU) to meet pediatric nutritional guidelines.[1-3] Daily maternal vitamin D dosages at or above 100 mcg (4,000 IU) achieve milk levels can potentially meet the 10 mcg daily infant goal intake, depending on the mother's underlying vitamin D status and daily infant milk intake. Obese mothers may have higher requirements.

### Drug Levels

The major forms of vitamin D present in breastmilk are cholecalciferol (vitamin D_3_), ergocalciferol (vitamin D_2_), and their respective 25-hydroxylates (25-OH) also known as calcidiols. Dihydroxylated metabolites are also present in milk, but in such low quantities that their contribution to total milk vitamin D activity is not routinely accounted for. The low potency C-3 stereoisomer of 25-OH-vitamin D_3_ is also present in milk. Analytical techniques that do not detect this isomer can potentially overestimate the true 25-OH-vitamin D_3_ level. Vitamin D partitions extensively into the fat fraction of whole milk after 1 to 2 days when stored under refrigeration.[4]

Human vitamin D deficiency is defined as a 25-OH-vitamin D serum level <20 mcg/L (<50 nmol/L), and vitamin D insufficiency as 20 to 30 mcg/L (50 to 75 nmol/L). The goal of vitamin D supplementation is to achieve a serum 25-OH-vitamin D level of 30 to 100 mcg/L (75 to 250 nmol/L).[5] Darker skin pigmentation is a risk factor for vitamin D deficiency due to decreased UVB-mediated cutaneous vitamin D_3_ synthesis.[6] U.S. infants and children with darker skin pigmentation do not achieve optimal synthesis, even during summer months, from everyday outdoor sun exposures.[7]

Milk levels of vitamin D and 25-OH-vitamin D are 10 to 20% and 1 to 2% of maternal blood levels, respectively.[8-11] As a mother's vitamin D blood levels increase due to increasing light exposure or dietary intake, milk vitamin D content also increases.[10,12-15] Maternal serum and milk levels and breastfed infant serum levels can be higher during summer and at lower latitudes due to increased sunlight availability and skin ultraviolet B light (UVB) exposure.[11,12,16-21] Levels are 1.5 to 2 times higher in hindmilk than in foremilk.[10]

United States Food and Drug Administration standards for dietary supplement labeling recommend mcg rather than the traditional “international units” (IU) when describing vitamin D doses. One mcg of D_2_ or D_3_ is equivalent to 40 IU. Many of the studies cited in this monograph were conducted prior to this standard being widely adopted. They also report level measurement results in IU/L to standardize and convert all measured vitamin D forms to total antirachitic activity since the 25-OH-vitamin D forms are 5 times as potent as their parent calciferol forms. Therefore, the original IU provided by the study authors are used when describing these studies throughout this monograph. Conversion to mcg are provided when describing infant exposures or maternal dosage recommendations.

Maternal Levels. Lactating women with nondeficient vitamin D status (serum 25-OH-vitamin D >20 mcg/L or >50 nmol/L) taking 400 to 2000 IU daily have an average or median reported total vitamin D antirachitic activity in their milk of 50 to 80 IU/L.[1,8,10,14,15,22-28] Based on these reported milk levels, an exclusively breastfed infant will ingest only 8 to 12 IU/kg (0.2 to 0.3 mcg/kg) daily of vitamin D, which is well below the 10 mcg daily requirement

In a study of eighteen breastfeeding mothers with nondeficient vitamin D status given 4000 IU daily of vitamin D, average milk levels were approximately 130 IU/L after 3 months of supplementation. Based on this reported average milk level, an exclusively breastfed infant would receive 20 IU/kg (0.5 mcg/kg) daily of vitamin D.[26]

Nineteen fully breastfeeding women were given either 400 or 6,400 IU daily of vitamin D_3_ beginning at 1 month postpartum. Dietary intake and skin pigmentation changes did not differ between the two groups. Average maternal baseline vitamin D serum levels were >30 mcg/L. Over 7 consecutive monthly measurements, average milk vitamin D levels increased from 59.6 IU/L at baseline to 76.3 IU/L at 7 months in the 400 IU daily group, and steadily increased in the 6,400 IU daily group from 82.4 IU/L at baseline, to 374.4 IU/L after 4 months, 555.2 IU/L after 5 months, 624.5 IU/L after 6 months, and 873.5 IU/L after 7 months. Milk level changes paralleled maternal vitamin D status changes. Maternal serum 25-OH-vitamin D levels in the 6,400 IU group increased from 34 to 58.8 mcg/L over the 7-month study period. The authors suggested that the increase in both milk and serum levels towards the end of the 7-month study period in both groups was due to increased outdoor activity and sun exposure coinciding with warmer months.[23] Based on the average milk concentration of 374.4 IU/L after 4 months of treatment in the 6,400 IU daily group, an exclusively breastfed infant would ingest about 60 IU/kg (1.5 mcg/kg) daily. This dosage could potentially meet the 10 mcg daily requirement for the average sized 5-month-old infant.

Forty exclusively breastfeeding mothers in the Northern US were given oral vitamin D_3_ 150,000 IU one time or 5000 IU daily for 28 days. Their infants were between 4 and 28 weeks old at study enrollment. Average milk vitamin D_3_ levels in the single dose group increased from below the limit of quantification (<280 IU/L) at baseline to approximately 1600 IU/L after 1 day, decreasing to 440 IU/L by 7 days after the dose, to undetectable again by day 14. Average milk D_3_ levels in the once daily group increased from undetectable at baseline to 320 IU/L by day 3 and remained at about 320 IU/L for the remaining 28-day study period; 25-OH-vitamin D was not detected in milk in either group.[11] Based on the reported average level, an exclusively breastfed infant would receive approximately 50 IU/kg (1.2 mcg/kg) daily from a maternal daily dosage of 5,000 IU D_3_.

In a mother taking long-term vitamin D_2_ 100,000 IU daily during pregnancy and lactation to maintain normal calcium and phosphorus status after a prepregnancy thyroid-parathyroidectomy, plus a daily prenatal vitamin containing 400 IU vitamin D, breastmilk antirachitic activity at 14 days postpartum was 6,700 IU/L. Milk vitamin D_2_ concentration was 126 mcg/L and 25-OH-vitamin D_2_ was 8.3 mcg/L.[29] These values are approximately 800 times and 80 times higher, respectively, than those normally seen in lactating women taking a 400 IU daily of vitamin D_2_ supplement.[8] Vitamin D_3_ forms were undetectable in milk. The mother's serum vitamin D_2_ and 25-OH-vitamin D_2_ levels were 500 times normal levels.

Eighty-five breastfeeding mothers in Finland were given an oral vitamin D_2_ or D_3_ supplement of 1000 IU daily, 2000 IU daily or no supplementation. Milk was collected at 8, 15, and 20 weeks postpartum. Milk levels were highest in September, and higher in September and May than December and February. Supplementation significantly increased milk antirachitic activity in winter months compared to no supplementation, but not in summer. Median hindmilk antirachitic activity in February was 51 IU/L in the 1,000 IU daily group and 92 IU/L in the 2,000 IU daily group. The range was 20 to 190 IU/L in both groups. For the nonsupplemented mothers in February, the median milk level was 35 IU/L ranging from 15 to 100 IU/L. Median hindmilk antirachitic activity in September was 136 IU/L in the 1,000 IU group, and 114 IU/L in the unsupplemented group, with a range of approximately 50 to 320 IU/L in both groups.[9] Diet, daily sunlight exposure, and maternal vitamin D status were not controlled for, and likely explain the highly variable milk levels reported. The positive effect of supplementation on vitamin D levels in winter but not in summer seen in this study has been also reported in pregnant mothers and their serum 25-OH-vitamin D levels.[30]

Thirty-six women in the Netherlands were randomized to receive a daily vitamin D supplement of either 400 IU, 1400 IU, 2400 IU, or 3400 IU beginning at 20 weeks gestation and continued for 4 weeks postpartum. A single breastmilk sample was collected at 4 weeks postpartum. Median milk levels were 33 IU/L, 83 IU/L, 150 IU/L, and 156 IU/L, respectively. Analyses confirmed a linear relationship between maternal dosage and milk level. The authors calculated that it would take a daily maternal dose of 8500 IU (21 mcg) to achieve milk levels sufficient to deliver the target 400 IU (10 mcg) daily to the breastfed infant.[31]

One hundred ninety mothers in Qatar were randomized to receive either 600 IU or 6000 IU vitamin D beginning within 4 weeks postpartum. Baseline milk levels were similar in both groups at around 20 IU/L. At 4 months postpartum, median milk levels were 12 IU/L and 186 IU/L, respectively. At 7 months postpartum they were 14.3 IU/L and 144 IU/L, respectively. Based on the milk levels in the 6000 IU (150 mcg) high-dose group, an exclusively breastfed infant would receive approximately 30 IU/kg (0.75 mcg/kg) daily of vitamin D.[32]

In a Danish study of 48 breastfeeding women with normal vitamin D status, 70 to 80% of whom were taking a 400 IU daily supplement, vitamin D and 25-OH-vitamin D milk levels were highest in July, approximately 3 nmol/L and 1.5 nmol/L, respectively, and lowest in February (<1 nmol/L for both). More milk samples collected in winter months were below the vitamin D detection limit of 0.14 nmol/L than in summer (49% vs 24%). The median total vitamin D antirachitic activity in milk was 130 IU/L in the summer months and 80 IU/L in winter. Breastmilk concentrations correlated with maternal median serum 25-OH-vitamin D concentrations, which were at their highest in July (90 nmol/L) and lowest in February (50 nmol/L).[10]

Five white-skinned, lactating mothers were exposed to artificial UVB light at approximately the same exposure as 30 minutes of clear, midday, midlatitude, summer sun. Their average breastmilk vitamin D_3_ levels increased from 0.15 mcg/L prior to exposure to a peak of 0.85 to 3.7 mcg/L 2 to 3 days after exposure. Vitamin D_3_ milk levels were still slightly above baseline, 0.24 to 0.4 mcg/L, at 14 days after exposure. Milk 25-OH-vitamin D_3_ and vitamin D_2_ did not significantly increase.[13]

Four hundred and sixty-seven women in Toronto, Canada had their vitamin D status evaluated during pregnancy at 28 to 31 weeks gestation, and again at 3 and 12 months postpartum. Two-thirds of the women studied had serum 25-OH-vitamin D <75 nmol/L throughout the study, and less than half were taking a standard vitamin D supplement. Their outdoor activity levels were considered low to moderate. Seasonal variation accounted for only a 5.4 nmol/L increase in serum 25-OH-vitamin D for those pregnant during winter and postpartum during spring and summer.[33] Although breastmilk vitamin D levels were not measured, this study suggests that seasonal changes in maternal blood and milk vitamin D levels are minimal in women living at high latitudes with low serum vitamin D levels, average outdoor exposure, and casual vitamin D supplementation.

A study comparing ten black and fifteen white exclusively breastfeeding mothers in a northern US city reported average milk levels of 34 IU/L and 64 IU/L, respectively. Vitamin D_3_, D_2_, and 25-OH-vitamin D_3_ levels were all significantly lower in the milk of the black mothers, but 25-OH-vitamin D_2_ was similar between the two groups. The vitamin D_3_ milk level was significantly lower in the black mothers even when controlling for their less self-reported outdoor exposure. Maternal average daily vitamin D intake was similar between the two groups, but daily intake of vitamin D_2_ contained in prenatal vitamins was higher in the white mothers, which resulted in a higher proportion of their total vitamin D intake coming from D_2_. The average maternal serum 25-OH-vitamin D level was 27 mcg/L in black mothers and 45 mcg/L in white mothers, which was not significantly different.[14] This study suggests that skin pigmentation-related D_3_ synthesis efficiency differences can result in lower milk vitamin D_3_ and 25-OH-vitamin D_3_ levels in darker skinned mothers despite similar vitamin D intake and similar baseline vitamin D status.

Infant Levels. When a mother has underlying vitamin D deficiency, her breastfed infant will likely have deficient 25-OH-vitamin D serum levels (<20 mcg/L) if the mother is taking only 400 to 1000 IU (10 to 25 mcg) daily,[19,34,35] and insufficient serum levels (20 to 30 mcg/L) when the mother is taking 2000 IU (50 mcg) daily.[27,36] But, the infant can potentially achieve sufficient serum levels (>30 mcg/L) when the mother takes 4,000 IU (100 mcg) or more daily.[32,37] When a breastfed infant is given a daily 400 IU supplement directly, average infant serum levels are sufficient (>30 mcg/L) without being excessive (>100 mcg/L) if the mother is also taking a daily 400 to 2,000 IU (10 to 25 mcg) supplement.[38] Pregnant women living in higher latitudes with underlying normal vitamin D status who take a 2,000 IU daily vitamin D supplement beginning in the second trimester of pregnancy will usually have infants born with sufficient vitamin D status, which can be maintained for at least 8 weeks postpartum through exclusive breastfeeding without infant supplementation.[39]

Forty exclusively breastfeeding mothers in the Northern US were given vitamin D_3_ 150,000 IU one time or 5000 IU daily for 28 days. Their infants were between 4 and 28 weeks old and 68% were vitamin D deficient at study enrollment. In the single dose group, average infant serum 25-OH-vitamin D levels increased from 16.3 mcg/L at baseline to 38.7 mcg/L at day 28.[11] A nearly identical increase was observed in the once daily group; from 16.9 mcg/L to 39.2 mcg/L.

Eighteen fully breastfeeding women in the southeast US with nondeficient vitamin D status were given either 2,000 or 4,000 IU daily vitamin D beginning at 1 month postpartum. Mothers were instructed to minimize sun exposure. After 3 months, average infant serum 25-OH-vitamin D levels increased from 7.9 to 27.8 mcg/L in the 2,000 IU daily group and from 13.4 to 30.8 mcg/L in the 4000 IU daily group.[26] This study demonstrates that, on average, a 4,000 IU daily vitamin D supplement in lactating women who have nondeficient underlying vitamin D status can achieve marginally normal status in their breastfeeding infant without giving additional vitamin D directly to the infant. Such a strategy would not necessarily be effective in every mother-infant pair, and therefore infant serum 25-OH-vitamin D monitoring is recommended to confirm efficacy when using this strategy.

One hundred forty-eight exclusively breastfeeding women in the Northeast and Southeast U.S. were given either 400 or 6,400 IU daily of vitamin D_3_ beginning within 4 to 6 weeks of delivery. Average baseline maternal serum 25-OH-vitamin D levels were >50 nmol/L, and average infant levels were <50 nmol/L (range undetectable to 113.8 nmol/L). Infants of mothers in the 400 IU daily group were given a 400 IU daily vitamin D supplement, while those in the 6,400 IU daily group were given placebo. After 4 and 7 months, most infants in both groups had serum 25-OH-vitamin D levels >75 nmol/L, achieving normal vitamin D status. The average levels at 4 months were 109 and 106.9 nmol/L in the 400 IU daily and 6,400 IU daily groups, respectively. At 7 months, average levels were 109.1 and 108.5 nmol/L, respectively, and the percentages of infants with levels <50 nmol/L were 4.3% and 4.2%, respectively.[40] Maternal and infant serum 25-OH-vitamin D levels were 20 to 25 nmol/L lower on average when mothers were obese (BMI 30 kg/sq. m or greater) compared to mothers who were not overweight (BMI less than 25 kg/sq. m). An association between maternal weight and lower levels was significant even after adjusting for maternal race, education and insurance status. This study suggests that obese mothers may require higher vitamin D supplementation dosages.[41]

One thousand three hundred healthy, non-obese, pregnant women in Dhaka, Bangladesh were randomized to receive an oral tablet of 4,200 IU, 16,800 IU, 28,000 IU of vitamin D3, or placebo once weekly beginning prenatally between 17- and 24-weeks gestational age. The placebo group and some in the 28,000 IU group continued to receive their assigned treatment for 26 weeks postpartum while the others stopped treatment after delivery. Baseline maternal vitamin D status was similar across all participants with 65% biochemically vitamin D deficient. Breastfeeding duration was similar between each of the groups. The median duration of exclusive breastfeeding was 12 to 14 weeks. Infant vitamin D supplementation was uncommon (<10%). One thousand one hundred sixty-four infants were available for analysis. At 3 and 6 months postpartum, average infant total 25-OH-vitamin D3 blood levels were approximately 90 nmol/L (36 mcg/L) and fewer than 5% of had blood levels indicating deficiency (< 50 nmol/L or < 20 mcg/L) in the group given postpartum maternal supplementation, compared to 40 to 50 nmol/L (16-20 mcg/L) and 50 to 60%, respectively, in the other groups.[42] Partial or no breastfeeding was associated with higher levels in the non-postpartum supplemented groups, likely due to vitamin D fortification of the available infant formula. Levels were similar regardless of breastfeeding status among infants in the postpartum supplementation group.[43] This study suggests that maternal postpartum vitamin D supplementation of 28,000 IU (700 mcg) once weekly is effective at improving infant vitamin D status when feeding breastmilk.

One hundred ninety mothers in Qatar were randomized to receive either 600 IU or 6000 IU vitamin D beginning within 4 weeks postpartum. Infants of the mothers in the low-dose group were given 400 IU daily while those in the high-dose group received daily placebo. At 4 and 7 months postpartum, average infant serum 25-OH-vitamin D levels rose from around 30 nmol/L in both groups to 105 to 109 nmol/L in the low maternal dose (with direct infant supplementation) and to 81 to 92 nmol/L in the high-dose group (without direct supplementation). The number of infants with serum levels of 50 nmol/L or greater were about 90% in both groups.[32]

In a Turkish study of 90 exclusively breastfed infants, the effects of maternal vitamin D_3_ 400 IU daily supplementation beginning during pregnancy and continuing postpartum was compared to no postpartum maternal vitamin D supplementation. Sun exposure of 3 or more days per week of at least 15 minutes daily was associated with a 5 mcg/L increase in serum 25-OH-vitamin D. Routinely wearing concealing clothing was associated with a 5 mcg/L decrease. Milk levels were not measured.[44]

In 38 exclusively breastfeeding women in the Northern U.S. participating in a 6-month long prospective study to determine risks of vitamin D deficiency and rickets in breastfed infants, investigators reported a significant positive correlation between weekly maternal and infant UVB exposure and infant 25-OH-vitamin D_3_ levels among all participants. In a subset of 13 infants born in winter and not given any vitamin D, average levels increased 13 mcg/L to 25.1 mcg/L between 6 weeks and 6 months of age, coinciding with increased UVB exposure over that time.[35]

In a study of 115 exclusively breastfed infants in northern India born with severe vitamin D deficiency (cord serum 25-OH-vitamin D <11 mcg/L), whose mothers were given 60,000 IU of oral vitamin D_3_ or placebo once daily for 10 days beginning on the day of delivery, average infant serum 25-OH-vitamin D levels at 6 months of age were twice as high (30 vs 15 mcg/L) in the supplemented group compared to the placebo group. The frequency of severe deficiency at 6 months of age was lower in the supplemented group compared to the placebo group (8% vs 44%).[45]

One hundred fifty-two vitamin D-deficient mothers in northern India were randomized to receive 120,000 IU (3000 mcg) of vitamin D one time within 7 days postpartum followed by the same dose at 6, 10, and 14 weeks postpartum to coincide with scheduled infant immunization, or placebo. Infants of mothers in the placebo group received vitamin D 400 IU (10 mcg) daily, while those in the treatment group received placebo. At 14 weeks, 70% were still exclusively breastfeeding in both groups. The median 25-OH-vitamin D serum levels were approximately 61 nmol/L in both groups, and 60% of infants had serum levels over 50 nmol/L in both groups.[37]

In a similar study in the same region of India, 114 mothers were randomized to receive vitamin D3 60,000 IU (1,500 mcg) or placebo as a single dose starting between 24 and 48 hours after delivery, and then repeated at 6, 10, and 14 weeks postpartum. At baseline, around 90% of all mothers and infants had vitamin D deficiency. Over 90% of participants were exclusively breastfeeding. None of the infants were directly supplemented during the 6-month study period and sun exposure was similar between the two groups. At 6 months of age, average infant serum 25-OH-vitamin D level was 19 mcg/L in the treatment group and 6 mcg/L in the placebo group, while vitamin D deficiency was present in 5% and 91% of infants, respectively. None of the infants were directly supplemented during the 6-month study period and sun exposure was similar between the two groups.[46]

Two hundred twenty healthy, non-obese, postpartum mothers in Rajasthan, India were randomized to receive 120,000 IU or 12,000 IU of vitamin D3 once a month for 12 months beginning in the first postpartum month. Mothers and infants were followed for 1 year. Exclusive breastfeeding in all participants at enrollment was implied but feeding status throughout the study was not reported. All infants had vitamin D deficiency at baseline. The median total 25-OH-vitamin D serum level in the infants of mothers in the high dose group increased from 7.1 mcg/L at baseline to 36.5 mcg/L at 12 months. Infants in the low dose group increased from 4.8 mcg/L to 17 mcg/L.[47]

### Effects in Breastfed Infants

Maternal daily doses of 400 to 6,400 IU (10 to 160 mcg) have not been associated with any short-term biochemical abnormalities in breastfed infants.[11,19,34-36,38,40,48]

An 11-day-old, exclusively breastfed, term, female neonate experienced asymptomatic, mild hypercalcemia (total serum calcium 11.4 mg/dL). The mother was taking maintenance vitamin D_2_ 100,000 IU daily to maintain normal calcium and phosphorus status after a pre-pregnancy thyroid-parathyroidectomy, plus a prenatal vitamin containing 400 IU daily vitamin D (form not specified) during pregnancy and lactation. Vitamin D_2_ and 25-OH-vitamin D_2_ levels in cord blood and in milk at 14 days of age were both markedly elevated. Serum vitamin D levels were not measured in the infant.[29] The combination of high daily breastmilk vitamin D_2_ intake plus a high infant serum level present at birth likely contributed to the abnormal calcium value.

In a study in northern India, short-term maternal use of oral 60,000 IU vitamin D_3_ once daily for 10 days beginning after birth was not associated with any differences in serum calcium or phosphorus levels, or of urinary calcium/creatinine ratios, in their exclusively breastfed infants at 14 weeks and 6 months of age compared to infants of mothers given placebo. Infants of mothers given vitamin D had a lower frequency of biochemical rickets compared to placebo (0 vs 17%), but no difference in the frequency of radiological rickets (3.6% vs 3.4%).[45]

One hundred fifty-two mothers in northern India, most of whom were vitamin D deficient, were randomized to receive 120,000 IU (3000 mcg) of vitamin D one time within 7 days postpartum followed by the same dose at 6, 10, and 14 weeks postpartum to coincide with scheduled infant immunization, or placebo. Infants of mothers in the placebo group received 400 IU (10 mcg) of daily vitamin D while those in the treatment group received placebo. At 14 weeks, infant growth parameters and serum biochemical indicators of bone mineral and liver homeostasis were similar between the two groups. At 9 months, dental growth and diarrheal or respiratory illness frequency were also not different.[38]

One hundred fourteen vitamin D deficient mothers in northern India were randomized to receive vitamin D3 60,000 IU (1,500 mcg) or placebo as a single dose starting between 24 and 48 hours after delivery, and then repeated at 6, 10, and 14 weeks postpartum. Over 90% of participants were exclusively breastfeeding. At 6 months of age, 6 infants in the control group and no infants in the treatment group developed biochemical rickets, while 2 infants and 1 infant, respectively, developed radiological rickets. Infants of mothers in the treatment group reportedly had normal serum calcium and phosphorus concentrations at 6 months of age, although specific results were not given, and this outcome was not reported for the control group.[46]

One hundred ninety mothers in Qatar were randomized to receive either 600 IU or 6000 IU vitamin D beginning within 4 weeks postpartum. Infants of the mothers in the low-dose group were given 400 IU daily while those in the high-dose group received daily placebo. At the scheduled 4- and 7-month postpartum study visits, infant growth parameters, serum calcium and parathyroid hormone levels, and parent reported infant health status, were not different between the two groups.[32]

Two hundred twenty healthy, non-obese, breastfeeding mothers in Rajasthan, India were randomized to receive 120,000 IU or 12,000 IU of vitamin D3 once a month for 12 months beginning in the first postpartum month. Infants in both groups had normal serum calcium, phosphate, and alkaline phosphate levels at baseline and at 12 months. There was no significant differences in growth parameters, bone mineral content or density between the two groups at 12 months. [47]

One thousand three hundred pregnant women in Dhaka, Bangladesh were randomized to receive an oral tablet of 4,200 IU, 16,800 IU, 28,000 IU of vitamin D3, or placebo once weekly beginning prenatally between 17- and 24-weeks gestational age. The placebo group and some in the 28,000 IU group continued to receive their assigned treatment for 26 weeks postpartum while the others stopped treatment after delivery. Baseline maternal vitamin D status was similar across all participants with 65% being biochemically vitamin D deficient. The median duration of exclusive breastfeeding was 12 to 14 weeks and was similar between each of the groups. Infant vitamin D supplementation was uncommon (<10%). One thousand one hundred sixty-four infants were available for analysis. There were no differences between the groups in infant growth at 1 year postpartum. There were also no differences in infant mortality, hospitalizations, respiratory tract infections, serum calcium status, or early childhood bone mineral density and grip strength. Infant hypercalcemia and hypercalciuria occurred rarely (≤1%) and did not differ between groups. Radiologically confirmed rickets occurred in 4 infants (0.3%), 3 in the placebo group and 1 in the lowest dose group. However, a difference between the groups could not be determined due to such a low incidence.[42] The frequency of infant biochemical rickets at 6 months of age was significantly higher in the placebo group (7.9%) compared to the high-dose group (1.3%), but not compared to the other groups.[49]

One hundred forty-eight exclusively breastfeeding postpartum patients were given either 400 or 6,400 IU daily of vitamin D3 beginning within 4 to 6 weeks of delivery. Average baseline infant serum 25-OH-vitamin D was <50 nmol/L (range undetectable to 113.8 nmol/L). Infants of mothers in the 400 IU daily group were given a 400 IU daily vitamin D supplement, while those in the 6,400 IU daily group were given placebo. There were no differences between the two groups in biochemical markers of calcium status, bone mineral content or density at 1, 4, or 7 months of age.[50,51]

Emerging evidence suggests adequate infant delivery of vitamin D through breastmilk from maternal supplementation during pregnancy and lactation is important for regulation of the developing infant immune system.[52,53]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Calcitriol

### References

1 Wagner CL, Greer FR. Prevention of rickets and vitamin D deficiency in infants, children, and adolescents. Pediatrics 2008;122:1142-52 18977996
2 Centers for Disease Control and Prevention. Breastfeeding and vitamin D supplementation. 2015.https://www.cdc.gov/breastfeeding/recommendations/vitamin_d.htm
3 Taylor SN. ABM Clinical Protocol #29: Iron, zinc, and vitamin D supplementation during breastfeeding. Breastfeed Med 2018;13:398-404 30016173
4 Jones KS, Meadows SR, Koulman A. Quantification and reporting of vitamin D concentrations measured in human milk by LC-MS/MS. Front Nutr 2023;10:1229445 38035362
5 Holick MF, Binkley NC, Bischoff-Ferrari HA, et al. Evaluation, treatment, and prevention of vitamin D deficiency: An Endocrine Society clinical practice guideline. J Clin Endocrinol Metab 2011;96:1911-30 21646368
6 Clemens TL, Adams JS, Henderson SL, et al. Increased skin pigment reduces the capacity of skin to synthesise vitamin D3. Lancet 1982;1:74-6 6119494
7 Godar DE, Pope SJ, Grant WB, et al. Solar UV doses of young Americans and vitamin D3 production. Environ Health Perspect 2012;120:139-43 21852226
8 Hollis BW. Individual quantitation of vitamin D_2_, vitamin D_3_, 25-hydroxyvitamin D_2_, and 25-hydroxyvitamin D_3_ in human milk. Anal Biochem 1983;131:211-9 6311049
9 Ala-Houhala M, Koskinen T, Parviainen MT, et al. 25-Hydroxyvitamin D and vitamin D in human milk: Effects of supplementation and season. Am J Clin Nutr 1988;48:1057-60 3421201
10 við Streym S, Højskov CS, Møller UK, et al. Vitamin D content in human breast milk: A 9-mo follow-up study. Am J Clin Nutr 2016;103:107-14
11 Oberhelman SS, Meekins ME, Fischer PR, et al. Maternal vitamin D supplementation to improve the vitamin D status of breast-fed infants: A randomized controlled trial. Mayo Clin Proc 2013;88:1378-87 24290111
12 Stoutjesdijk E, Schaafsma A, Nhien NV, et al. Milk vitamin D in relation to the 'adequate intake' for 0-6-month-old infants: A study in lactating women with different cultural backgrounds, living at different latitudes. Br J Nutr 2017;118:804-12 29103383
13 Greer FR, Hollis BW, Cripps DJ, et al. Effects of maternal ultraviolet B irradiation on vitamin D content of human milk. J Pediatr 1984;105:431-3 6088746
14 Specker BL, Tsang RC, Hollis BW. Effect of race and diet on human-milk vitamin D and 25-hydroxyvitamin D. Am J Dis Child 1985;139:1134-7 2998180
15 Aghajafari F, Field CJ, Weinberg AR, et al. Both mother and infant require a vitamin D supplement to ensure that infants' vitamin D status meets current guidelines. Nutrients 2018;10:429 29596362
16 Ziegler EE, Hollis BW, Nelson SE, et al. Vitamin D deficiency in breastfed infants in Iowa. Pediatrics 2006;118:603-10 16882813
17 Dawodu A, Davidson B, Woo JG, et al. Sun exposure and vitamin D supplementation in relation to vitamin D status of breastfeeding mothers and infants in the global exploration of human milk study. Nutrients 2015;7:1081-93 25665158
18 Lichtenstein P, Specker BL, Tsang RC, et al. Calcium-regulating hormones and minerals from birth to 18 months of age: a cross-sectional study. I. Effects of sex, race, age, season, and diet on vitamin D status. Pediatrics 1986;77:883-90 3487068
19 Ala-Houhala M. 25-Hydroxyvitamin D levels during breast-feeding with or without maternal or infantile supplementation of vitamin D. J Pediatr Gastroenterol Nutr 1985;4:220-6 3989622
20 Wheeler BJ, Taylor BJ, de Lange M, et al. A longitudinal study of 25-hydroxy vitamin D and parathyroid hormone status throughout pregnancy and exclusive lactation in New Zealand mothers and their infants at 45 degrees S. Nutrients 2018;10:86 29342867
21 Tsugawa N, Nishino M, Kuwabara A, et al. Comparison of vitamin D and 25-hydroxyvitamin D concentrations in human breast milk between 1989 and 2016-2017. Nutrients 2021;13:573 33572283
22 Hollis BW, Frank NE. Quantitation of vitamin D_2_, vitamin D_3_, 25-hydroxyvitamin D_2_, and 25-hydroxyvitamin D_3_ in human milk. Methods Enzymol 1986;123:167-76 3010037
23 Wagner CL, Hulsey TC, Fanning D, et al. High-dose vitamin D3 supplementation in a cohort of breastfeeding mothers and their infants: A 6-month follow-up pilot study. Breastfeed Med 2006;1:59-70 17661565
24 Atkinson SA, Reinhardt TA, Hollis BW. Vitamin D activity in maternal plasma and milk in relation to gestational stage at delivery. Nutr Res 1987;7:1005-11.doi:10.1016/S0271-5317(87)80171-9
25 Wall CR, Stewart AW, Camargo CA, Jr, et al. Vitamin D activity of breast milk in women randomly assigned to vitamin D3 supplementation during pregnancy. Am J Clin Nutr 2016;103:382-8 26702121
26 Hollis BW, Wagner CL. Vitamin D requirements during lactation: High-dose maternal supplementation as therapy to prevent hypovitaminosis D for both the mother and the nursing infant. Am J Clin Nutr 2004;80:1752S-8S 15585800
27 Saadi HF, Dawodu A, Afandi B, et al. Effect of combined maternal and infant vitamin D supplementation on vitamin D status of exclusively breastfed infants. Matern Child Nutr 2009;5:25-32 19161542
28 Han SM, Huang F, Derraik JGB, et al. A nutritional supplement during preconception and pregnancy increases human milk vitamin D but not B-vitamin concentrations. Clin Nutr 2023;42:2443-56.doi:10.1016/j.clnu.2023.09.009 38411017
29 Greer FR, Hollis BW, Napoli JL. High concentrations of vitamin D_2_ in human milk associated with pharmacologic doses of vitamin D_2_. J Pediatr 1984;105:61-4 6610738
30 Hillman LS, Haddad JG. Perinatal vitamin D metabolism. III. Factors influencing late gestational human serum 25-hydroxyvitamin D. Am J Obstet Gynecol 1976;125:196-200 1266899
31 Stoutjesdijk E, Schaafsma A, Kema IP, et al. Influence of daily 10-85 microgram vitamin D supplements during pregnancy and lactation on maternal vitamin D status and mature milk anti rachitic activity. Br J Nutr 2019;121:426-38 30526692
32 Dawodu A, Salameh KM, Al-Janahi NS, et al. The effect of high-dose postpartum maternal vitamin D supplementation alone compared with maternal plus infant vitamin D supplementation in breastfeeding infants in a high-risk population. A randomized controlled trial. Nutrients 2019;11:1632 31319554
33 Kramer CK, Ye C, Swaminathan B, et al. The persistence of maternal vitamin D deficiency and insufficiency during pregnancy and lactation irrespective of season and supplementation. Clin Endocrinol (Oxf) 2016;84:680-6 26641010
34 Rothberg AD, Pettifor JM, Cohen DF, et al. Maternal-infant vitamin D relationships during breast-feeding. J Pediatr 1982;101:500-3 7119949
35 Greer FR, Marshall S. Bone mineral content, serum vitamin D metabolite concentrations, and ultraviolet B light exposure in infants fed human milk with and without vitamin D_2_ supplements. J Pediatr 1989;114:204-12 2783734
36 Ala-Houhala M, Koskinen T, Terho A, et al. Maternal compared with infant vitamin D supplementation. Arch Dis Child 1986;61:1159-63 3813608
37 Chandy DD, Kare J, Singh SN, et al. Effect of vitamin D supplementation, directly or via breast milk for term infants, on serum 25 hydroxyvitamin D and related biochemistry, and propensity to infection: A randomised placebo-controlled trial. Br J Nutr 2016;116:52-8 27184759
38 Czech-Kowalska J, Latka-Grot J, Bulsiewicz D, et al. Impact of vitamin D supplementation during lactation on vitamin D status and body composition of mother-infant pairs: A MAVID randomized controlled trial. PLoS One 2014;9:e107708 25232839
39 March KM, Chen NN, Karakochuk CD, et al. Maternal vitamin D(3) supplementation at 50 mcg/d protects against low serum 25-hydroxyvitamin D in infants at 8 wk of age: A randomized controlled trial of 3 doses of vitamin D beginning in gestation and continued in lactation. Am J Clin Nutr 2015;102:402-10 26156737
40 Hollis BW, Wagner CL, Howard CR, et al. Maternal versus infant vitamin D supplementation during lactation: A randomized controlled trial. Pediatrics 2015;136:625-34 26416936
41 Sen S, Penfield-Cyr A, Hollis BW, et al. Maternal obesity, 25-hydroxy vitamin D concentration, and bone density in breastfeeding dyads. J Pediatr 2017;187:147-52.e1 28549637
42 Roth DE, Morris SK, Zlotkin S, et al. Vitamin D supplementation in pregnancy and lactation and infant growth. N Engl J Med 2018;379:535-46 30089075
43 Levy B, O'Callaghan KM, Qamar H, et al. Basal vitamin D status and supplement dose are primary contributors to maternal 25-hydroxyvitamin D response to prenatal and postpartum cholecalciferol supplementation. J Nutr 2021;151:3361-78 34302350
44 Buğrul F, Devecioğlu E, Ozden T, et al. Effect of maternal and infant vitamin D supplementation on vitamin D levels of breastfed infants. Turk J Pediatr 2013;55:158-63 24192675
45 Naik P, Faridi MMA, Batra P, et al. Oral supplementation of parturient mothers with vitamin D and its effect on 25OHD status of exclusively breastfed infants at 6 months of age: A double-blind randomized placebo controlled trial. Breastfeed Med 2017;12:621-8 29027817
46 Trivedi M, Faridi MMA, Aggarwal A, et al. Oral vitamin D supplementation to mothers during lactation- effect of 25(OH)D concentration on exclusively breastfed infants at 6 months of age: A randomized double-blind placebo-controlled trial. Breastfeed Med 2020;15:237-45 32181677
47 Ramot R, Yadav S, Vishnoi SK, et al. Effect of maternal supplementation with two different doses of vitamin D during lactation on vitamin D status, anthropometry and bone mass of infants: A randomized controlled trial. Indian Pediatr 2022;59:276-82 35014613
48 Basile LA, Taylor SN, Wagner CL, et al. The effect of high-dose vitamin D supplementation on serum vitamin D levels and milk calcium concentration in lactating women and their infants. Breastfeed Med 2006;1:27-35 17661558
49 Lautatzis ME, Keya FK, Al Mahmud A, et al. Maternal vitamin D supplementation and infantile rickets: Secondary analysis of a randomized trial. Pediatrics 2024;153 38424519
50 Wagner CL, Hulsey TC, Ebeling M, et al. Safety aspects of a randomized clinical trial of maternal and infant vitamin D supplementation by feeding type through 7 months postpartum. Breastfeed Med 2020;15:765-75 32915638
51 Andrews L, Phlegar K, Baatz JE, et al. Comparison of infant bone mineral content and density after infant daily oral vit D 400 IU supplementation versus nursing mother oral 6,400 IU supplementation: A randomized controlled lactation study. Breastfeed Med 2022;17:493-500 35271380
52 El-Heis S, D'Angelo S, Curtis EM, et al. Maternal antenatal vitamin D supplementation and offspring risk of atopic eczema in the first 4 years of life: Evidence from a randomized controlled trial. Br J Dermatol 2022;187:659-66 35763390
53 Newton DA, Baatz JE, Chetta KE, et al. Maternal vitamin D status correlates to leukocyte antigenic responses in breastfeeding infants. Nutrients 2022;14:1266 35334923

## Substance Identification

### Substance Name

Vitamin D

### CAS Registry Number

67-97-0; 50-14-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vitamins